# Valdecoxib

CASRN: 181695-72-7

## Drug Levels and Effects

### Summary of Use during Lactation

Valdecoxib was removed from sale in the United States by the U.S. Food and Drug Administration because of long-term cardiovascular toxicity. Limited information indicates that levels of valdecoxib in breastmilk are low. Because there is little published experience with valdecoxib safety during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A review article states that breastmilk levels of valdecoxib are much less than 200 mcg/L based on unpublished studies from the author's laboratory.[1]

Valdecoxib is the active metabolite that is rapidly formed from parecoxib. A single 40 mg dose of parecoxib was given intravenously to 40 mothers at an average of 41.9 hours after delivery. Four milk samples were collected over the next 24 hours. The average infant dosages in breastmilk were 0.24 mcg/kg daily for parecoxib and 1.82 mcg/kg daily for valdecoxib. This was equivalent to 0.63% of the weight-adjusted maternal dose in parecoxib equivalents, mostly excreted as valdecoxib. The half-life of valdecoxib in breastmilk was 8.5 hours.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A single 40 mg dose of parecoxib, a prodrug of valdecoxib, was given intravenously to 40 mothers at an average of 41.9 hours after delivery. The neonatal adaptive score of the breastfed infants was normal at an average of 21.8 hours after the dose.[2]

### Effects on Lactation and Breastmilk

A study compared valdecoxib 20 mg and placebo twice daily for their opiate-sparing activity in post-cesarean section pain. All patients received epidural fentanyl and bupivacaine as well as intraspinal morphine for postoperative pain. No difference was observed in breastfeeding success rate between mothers who received valdecoxib (n = 25) and placebo (n = 23).[3]

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Hale TW. Medications in breastfeeding mothers of preterm infants. Pediatr Ann 2003;32:337–47.12774709
2 Paech MJ, Salman S, Ilett KF, et al. Transfer of parecoxib and its primary active metabolite valdecoxib via transitional breastmilk following intravenous parecoxib use after cesarean delivery: A comparison of naïve pooled data analysis and nonlinear mixed-effects modeling. Anesth Analg 2012;114:837–44.22344242
3 Carvalho B, Chu L, Fuller A, et al. Valdecoxib for postoperative pain management after cesarean delivery: A randomized, double-blind, placebo-controlled study. Anesth Analg 2006;103:664–70.16931678

## Substance Identification

### Substance Name

Valdecoxib

### CAS Registry Number

181695-72-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal